# Bortezomib

CASRN: 179324-69-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of bortezomib during breastfeeding. Because bortezomib is 83% bound to plasma proteins, the amount in milk is likely to be low. However, because of its potential toxicity in the breastfed infant and its half-life of up to 193 hours, the manufacturer recommends that breastfeeding be discontinued during bortezomib therapy and for 2 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Bortezomib

### CAS Registry Number

179324-69-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Proteasome Inhibitors